# Eleuthero

CASRN: 84696-12-8

## Drug Levels and Effects

### Summary of Use during Lactation

Eleuthero (Eleutherococcus senticosus) is also known as Siberian ginseng, but it is not related to true ginseng and has different constituents. Eleuthero contains eleutherosides--eleutherosides B (syringin) and E (syringaresinol) that are used to identify Siberian ginseng. Some other ingredients are acanthosides, phytosterols, triterpene saponins, dihydrodehydrodiconiferyl alcohol monopyranose, glycosides, 5'-O-caffeoylquinic acid isomers, glucopyranosides, and lignans. Eleuthero has no specific uses during breastfeeding, but is most often used as an adaptogen (i.e., to increase endurance and improve memory). It is also used to boost immunity, and as an antimicrobial and chemoprotectant. However, no good human evidence supports any of these uses. No data exist on the safety and efficacy of eleuthero in nursing mothers or infants. In general, it is well tolerated. It may increase blood pressure, increase bleeding and increase blood sugar. Breast tenderness has been reported. Most sources recommend against the use of eleuthero during breastfeeding because of a lack of safety data.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother who took a product labeled as "pure Siberian ginseng" during pregnancy and breastfeeding gave birth to a hirsute Caucasian infant with thick black pubic hair, hair on the whole forehead, swollen red nipples, and enlarged testes. The infant's serum testosterone, cortisol and 17-hydroxyprogesterone were within normal limits. After breastfeeding was stopped at 2 weeks of age, the excess hair began to fall out and was gone by 7.5 weeks of age.[1] Later analysis of the product found that it was not Eleutherococcus, but the bark of the silk vine (Periploca sepium), possibly contaminated with some other unidentified product.[2,3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Koren G, Randor S, Martin S, et al. Maternal ginseng use associated with neonatal androgenization. JAMA 1990;264:2866.2232076
2 Waller DP, Martin AM, Farnsworth NR, et al. Lack of androgenicity of Siberian ginseng. JAMA 1992;267:2329.1564770
3 Foster S, Tyler VE. Tyler's honest herbal. A sensible guide to the use of herbs and related remedies. 4th ed. New York: Haworth Herbal Press; 1999

## Substance Identification

### Substance Name

Eleuthero

### Scientific Name

Eleutherococcus senticosus

### CAS Registry Number

84696-12-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal